# Brinzolamide

CASRN: 138890-62-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of brinzolamide ophthalmic drops during breastfeeding. French guidelines recommend ophthalmic carbonic anhydrase inhibitor drops such as brinzolamide as a preferred therapy for glaucoma during breastfeeding.[1] To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetazolamide, Dorzolamide

### References

1 Blumen-Ohana E, Sellem E. Pregnancy & glaucoma: SFO-SFG recommendations. J Fr Ophtalmol 2020;43:63-6.31813552

## Substance Identification

### Substance Name

Brinzolamide

### CAS Registry Number

138890-62-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiglaucoma Agents

Carbonic Anhydrase Inhibitors